# Urea C 13

CASRN: 58069-82-2

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of urea C13 as a diagnostic agent. Because carbon 13 is not radioactive, no special precautions are required for nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Urea C 14

## Substance Identification

### Substance Name

Urea C 13

### CAS Registry Number

58069-82-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Carbon Isotopes

Diagnostic Agents